# Moxidectin

CASRN: 113507-06-5

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of moxidectin during breastfeeding. However, amounts in breastmilk appear to be low and would not be expected to cause any adverse effects in breastfed infants. Although labeling recommends withholding breastfeeding for 7 days after a dose, this appears to be unnecessary; however, withholding breastfeeding for 1 day would decrease infant exposure by 40%. Until more data become available, moxidectin should be used with caution during breastfeeding, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Twelve lactating women who averaged 29.6 weeks (range 21 to 100 weeks) postpartum and had weaned their infants were given moxidectin 8 mg orally as a single dose. A breast pump was used to collect milk samples for at least 30 days, and in some, at various times for up to 90 days after the dose. The total amount of drug excreted into breastmilk averaged 0.056 mg over the study period, which was 8.7% (SD 3.2%) of the weight-adjusted maternal dose. The amount of moxidectin excreted into breastmilk tended to be higher in some women with lower maternal body weight.[1]

A physiologically based pharmacokinetic (PBPK) model using data from this study was developed and compared to results of animal exposure studies. It concluded that even with no interruption of breastfeeding after a dose, the dose that an exclusively breastfed infant would receive would be well below the no observed adverse effect level (NOAEL) in animal studies. Withholding breastfeeding for 24 hours would result in about a 40% decrease in infant exposure.[2]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Korth-Bradley JM, Parks V, Chalon S, et al. Excretion of moxidectin into breast milk and pharmacokinetics in healthy lactating women. Antimicrob Agents Chemother 2011;55:5200-4.21896908
2 Wood ND, Smith D, Kinrade SA, et al. The use of quantitative clinical pharmacology approaches to support moxidectin dosing recommendations in lactation. PLoS Negl Trop Dis 2024;18:e0012351.39102440

## Substance Identification

### Substance Name

Moxidectin

### CAS Registry Number

113507-06-5

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Infective Agents

Antiparasitic Agents

Anthelmintics

Antinematodal Agents

Insecticides

Macrolides